# Diazepam

CASRN: 439-14-5

## Drug Levels and Effects

### Summary of Use during Lactation

Diazepam is excreted into breastmilk and it and its active metabolite, nordiazepam, accumulate in the serum of breastfed infants with repeated doses. Because the half-life of diazepam and nordiazepam are long, timing breastfeeding with respect to the dose is of little or no benefit in reducing infant exposure. A safety scoring system finds diazepam possible to use cautiously during breastfeeding.[1] One study found that a high dose of diazepam given during tubal ligation surgery increased the risk of infant weight loss and hyperbilirubinemia postoperatively. Other agents are preferred, especially while nursing a newborn or preterm infant. After a single dose of diazepam, as for sedation before a procedure or for a seizure, there is usually no need to wait to resume breastfeeding, although with a newborn or preterm infant, a cautious approach would be to wait a period of 6 to 8 hours before resuming nursing. During long-term use, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Diazepam is metabolized to the active metabolites nordiazepam (desmethyldiazepam) and temazepam, which are in turn metabolized to the active metabolite oxazepam.

Maternal Levels. Three patients were given diazepam 10 mg orally 3 times daily for the 6 days after delivery. Average milk levels of diazepam plus nordiazepam were 79 mcg/L after 4 days (total diazepam dosage130 mg) and 130 mcg/L after 6 days (total diazepam dosage 190 mg). Oxazepam was not detected.[2]

In a 1-day postpartum woman, a colostrum diazepam level of 100 mcg/L milk level was found 25 hours after the last of 3 intravenous 5 mg doses of diazepam given over a 4-hour period.[3]

Four women were given diazepam 10 mg at bedtime for 6 days, beginning 3 days postpartum. Each had also received intravenous diazepam 20 mg immediately prior to delivery. Milk levels were collected 9.25 and 23.5 hours after each dose from days 3 to 9 postpartum. Milk levels of diazepam and nordiazepam did not differ markedly between the collection times and ranged from 17 to 39 mcg/L for diazepam and 19 to 52 mcg/L for nordiazepam.[4]

Breastmilk levels of 27 to 164 mcg/L of diazepam plus nordiazepam were found at various times between 9 days and 3.5 months postpartum during an irregular regimen of 6 to 10 mg daily of oral diazepam in 1 woman.[5]

A woman who had been abusing benzodiazepines was taking diazepam 80 mg and oxazepam 30 mg daily at the time of study. Milk samples were taken before and after the morning feeding following the morning dose of diazepam during a 30-day tapering dosage regimen. The average of the pre- and post-feed diazepam milk levels were 185 and 307 mcg/L, and average nordiazepam milk levels were 124 and 141 mcg/L on days 14 and 15 during maternal intake of diazepam 40 mg daily. The average of the pre- and post-feed diazepam milk levels were 200 and 158 mcg/L, and average nordiazepam milk levels were 140 and 85 mcg/L on days 23 and 25 during maternal intake of diazepam 30 mg daily. The average of the pre- and post-feed diazepam milk levels was 67 mcg/L, and average nordiazepam milk levels was 42 mcg/L on days 30 during maternal intake of diazepam 10 mg daily. Nine days after discontinuing diazepam, milk diazepam and nordiazepam were both 6 mcg/L.[6]

Eight women who were at least 1 month postpartum received intravenous diazepam during a surgical sterilization procedure. Dosages ranged from 2.5 to 10 mg. Diazepam and nordiazepam were undetectable (<150 mcg/L) in the breastmilk of any of the women. The authors estimated that the maximum systemic exposure of one of the breastfed infants would be 3% of the mother’s.[7]

Infant Levels. Three infants were breastfed from birth while their mothers were receiving diazepam 10 mg 3 times daily. Infant serum levels were measured on days 4 and 6 of life. On day 4, average infant serum levels were 172 mcg/L of diazepam and 243 mcg/L of nordiazepam. On day 6, average infant serum levels dropped to 74 mcg/L of diazepam and 31 mcg/L of nordiazepam, mostly due to a large drop in one of the infants.[2]

A fully breastfed infant was 32 days old at the time of serum sampling. His mother was taking diazepam 6 to 10 mg daily and had taken 2 mg of diazepam 10 hours before infant serum samples were taken. The infant’s diazepam serum level was 0.7 mcg/L and nordiazepam was 46 mcg/L. The mother’s simultaneous serum levels were 100 and 200 mcg/L for the drug and metabolite, respectively.[5]

### Effects in Breastfed Infants

Three infants were breastfed from birth while their mothers were receiving diazepam 10 mg 3 times daily. The authors noticed no lethargy or hypoventilation in the infants during the 6-day observation period. The authors expressed concern that nordiazepam may compete with bilirubin for hepatic glucuronide conjugation in the neonate.[2]

A nursing mother was given diazepam 10 mg orally 3 times a day beginning on day 5 postpartum. Weight loss, lethargy and an EEG consistent with sedative effect in her 8-day-old was probably caused by diazepam or its metabolites in breastmilk.[8]

Of 8 infants breastfed from birth during maternal diazepam therapy (dosages unspecified), 3 had mild jaundice during the first few days postpartum, although this was not thought by the authors to be unusual.[9]

Sedation was reported in the breastfed newborn infant of a mother taking oral diazepam 6 to 10 mg daily if the infant was nursed within a few hours of a dose, but not if she nursed 8 or more hours after a dose. Infant sedation was probably caused by diazepam and its major metabolite in breastmilk.[5]

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. About 10% of mothers took diazepam while breastfeeding and none reported sedation in her infant.[10]

In a longitudinal study of women taking medications during breastfeeding, some mothers who were taking diazepam reported discontinuing breastfeeding because of drowsiness in their breastfed infants.[11]

A retrospective chart review of 298 mothers and infants born at 37 weeks or beyond was conducted to determine the effects of ketamine and diazepam on breastfed infants after maternal tubal ligation surgery. Surgery occurred on a median of day 2 (range 1 to 6) postpartum. Most infants were fully breastfed, with breastfeeding resumed 2 to 4 hours after the procedure. Infants of mothers who received a dosage of diazepam of 0.1 mg/kg or greater during the operation had a 9-fold increased risk of clinically significant weight loss in the day after surgery and a 3-fold risk of hyperbilirubinemia requiring phototherapy than infants whose mothers received a dose lower than this.[12]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Anxiety) Lorazepam, Oxazepam, Temazepam (Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e126.30601177
2 Erkkola R, Kanto J. Diazepam and breast-feeding. Lancet 1972;299:1235–6.
3 Horning MG, Stillwell WG, Nowlin J, . Identification and quantification of drugs and drug metabolites in human breast milk using GC-MS-COM methods. Mod Probl Paediatr 1975;15:73–9.
4 Brandt R. Passage of diazepam and desmethyldiazepam into breast milk. Arzneimittelforschung 1976;26:454–7.989345
5 Wesson DR, Camber S, Harkey M, Smith DE. Diazepam and desmethyldiazepam in breast milk. J Psychoactive Drugs 1985;17:55–6.3920372
6 Dusci LJ, Good SM, Hall RW, Ilett KF. Excretion of diazepam and its metabolites in human milk during withdrawal from combination high dose diazepam and oxazepam. Br J Clin Pharmacol 1990;29:123–6.2105100
7 Borgatta L, Jenny RW, Gruss L, . Clinical significance of methohexital, meperidine, and diazepam in breast milk. J Clin Pharmacol 1997;37:186–92.9089420
8 Patrick MJ, Tilstone WJ, Reavey P. Diazepam and breast-feeding. Lancet 1972;299:542–3.
9 Cole AP, Hailey DM. Diazepam and active metabolite in breast milk and their transfer to the neonate. Arch Dis Child 1975;50:741–42.1190825
10 Kelly LE, Poon S, Madadi P, Koren G. Neonatal benzodiazepines exposure during breastfeeding. J Pediatr 2012;161:448–51.22504099
11 Chaves RG, Lamounier JA, Cesar CC. Association between duration of breastfeeding and drug therapy. Asian Pac J Trop Dis 2011;1:216–21. doi:10.1016/j.reprotox.2016.03.022
12 Gilder ME, Tun NW, Carter A, . Outcomes for 298 breastfed neonates whose mothers received ketamine and diazepam for postpartum tubal ligation in a resource-limited setting. BMC Pregnancy Childbirth 2021;21:121.33563234

## Substance Identification

### Substance Name

Diazepam

### CAS Registry Number

439-14-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines